# Dapivirine

CASRN: 244767-67-7

## Drug Levels and Effects

### Summary of Use during Lactation

Dapivirine is investigational in the United States, but available overseas as a vaginal ring for pre-exposure prophylaxis of HIV infections (PrEP). In this dosage form, it is acceptable to use during breastfeeding. No vaginal dysbiosis was found after use of the dapivirine ring during lactation.[1]

### Drug Levels

Maternal Levels. Sixteen lactating women who had weaned their infants used the dapivirine vaginal ring for 14 days and provided milk, blood and cervicovaginal fluid samples for analysis. Milk samples were obtained on days 0, 1, 7 and 14 during use of the insert and on day 16, two days after its removal. The mean breastmilk concentration was 676 ng/L (range 297 to 1,420 ng/L). This translated to an estimated average infant dosage of 74.3 ng/kg daily. The average half-life in milk was 45.8 hours.[2]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of emtricitabine and tenofovir disoproxil fumarate as prophylaxis against HIV infection. In women randomized to dapivirine (n = 148), dapivirine concentrations in breastmilk averaged 682.5 ng/L during the first week of use and trended downward to 664.5 ng/L in the third month of use. At 2 weeks after discontinuation, milk dapivirine averaged 16.7 ng/L.[3]

Infant Levels. A clinical trial compared the dapivirine vaginal ring 25 mg monthly to emtricitabine and tenofovir disoproxil fumarate as prophylaxis against HIV infection. In the infants of women randomized to dapivirine (n = 147), dapivirine was detected in 15% of infants’ serum after 2 weeks of use, but levels were below the level of quantification (<10 ng/L). In the third month of use, the drug was detectable in the serum of only 5%of infants, but below the level of quantification. At 2 weeks after drug discontinuation, no infants had detectable dapivirine in their serum.[3]

### Effects in Breastfed Infants

A study compared the dapivirine vaginal ring to emtricitabine plus tenofovir for prophylaxis of HIV infections. Of 148 mother-infant pairs who received the dapivirine vaginal ring, no infants had reports of adverse events attributable to maternal dapivirine therapy.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Petrina MAB, Dong TQ, Beamer M, . Vaginal microbiota and cytokines among pregnant and breastfeeding women in clinical trials of the dapivirine vaginal ring and oral tenofovir disoproxil fumarate/emtricitabine. Open Forum Infect Dis 2026;13:ofag329.42311653
2 Noguchi LM, Hoesley C, Kelly C, . Pharmacokinetics of dapivirine transfer into blood plasma, breast milk, and cervicovaginal fluid of lactating women using the dapivirine vaginal ring. Antimicrob Agents Chemother 2019;63:e01930-18.30602513
3 Noguchi LM, Owor M, Mgodi NM, . Safety and drug quantification of the dapivirine vaginal ring and oral pre-exposure prophylaxis in breastfeeding mother-infant pairs (MTN-043): A phase 3B, open-label, randomised trial. Lancet HIV 2025;2:e180-e90.

## Substance Identification

### Substance Name

Dapivirine

### CAS Registry Number

244767-67-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors